# Rosiglitazone

CASRN: 122320-73-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of rosiglitazone during breastfeeding. Rosiglitazone is over 99% protein bound in plasma, so it is unlikely to pass into breastmilk in clinically important amounts. The manufacturer recommends avoiding breastfeeding during rosiglitazone use, so pioglitazone might be a better choice of the drugs in this class for nursing mothers.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acarbose (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM1/), Colesevelam (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM516/), Glipizide (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM127/), Glyburide (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM128/), Insulin (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM147/), Metformin (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM173/), Miglitol (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM407/), Semaglutide (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM1383/), Tirzepatide (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM1383/)

## Substance Identification

### Substance Name

Rosiglitazone

### CAS Registry Number

122320-73-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypoglycemic Agents

Thiazolidinediones